# Butalbital

CASRN: 77-26-9

## Drug Levels and Effects

### Summary of Use during Lactation

Butalbital in breastmilk has caused poor feeding and vomiting in one infant. Other agents are preferred, especially while nursing a newborn or preterm infant. If butalbital is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. A 7-day-old breastfed infant's urine was qualitatively positive for barbiturate after his mother took a combination of butalbital 50 mg with acetaminophen 325 mg and caffeine 50 mg every 6 hours for 24 hours.[1]

### Effects in Breastfed Infants

The mother of a newborn took a product containing acetaminophen 325 mg, butalbital 50 mg, and caffeine 40 mg every 6 hours for 24 hours for a spinal headache, with the last dose a day prior to presentation at the emergency department. Her 7-day-old infant had a history of 1 to 2 days of poor feeding, lethargy and vomiting. The infant was somnolent, lethargic, and demonstrating diminished reflexes. The urine was qualitatively positive for barbiturate and had also had 1 mg/L of caffeine 15 hours after hospital admission. The infant's symptoms resolved within 24 hours. The symptoms were probably caused by butalbital.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Vohra V, Marraffa JM. Maternal use of acetaminophen-butalbital-caffeine product resulting in neonate butalbital exposure through breast milk. Clin Toxicol 2019;57:549. doi:10.1080/15563650.2019.1598646

## Substance Identification

### Substance Name

Butalbital

### CAS Registry Number

77-26-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Barbiturates

GABA Modulators

Hypnotics and Sedatives